# Black Seed

CASRN: 90064-32-7

## Drug Levels and Effects

### Summary of Use during Lactation

Black seed (Nigella sativa) contains an essential oil containing a wide variety of terpenes, thymoquinone, beta-elemene and other many constituents. Black seed and a related species (Nigella arvensis) have been used orally as galactogogues in India, Türkiye and the Middle East;[1-7] however, no scientifically valid clinical trials support this use in humans.[8] One study found a slightly greater increase in serum prolactin than placebo, but no evidence of growth promotion in infants.[9] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[10,11] The oil has also been used topically. No data exist on the excretion of any components of black seed into breastmilk or on the safety and efficacy of black seed in infants. Limited information indicates that black seed is generally well tolerated. Black seed oil can cause allergic contact dermatitis.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

One hundred fifty-eight mothers in Iran of who reported difficulty in breastfeeding were given either a proprietary mixture of herbs (Shirafza Drop) or a chlorophyll solution as a placebo. The herbal mixture contained the purported galactogogues fennel, anise, cumin, black seed, and parsley. Infant ages ranged between 0 and 6 months and they were exclusively breastfed. Weight gain of the infants was measured over time. No difference in infant weight gain was seen between the two groups of infants.[12] Blinding and randomization in this study is unclear.

A single-blinded study was performed on mothers having baby of 1 month of age or less with complaints of insufficient breast milk secretion and poor anthropometric measures of her child (weight, height, head circumference). Mothers were randomly assigned to receive either 1 gram of ground Nigella sativa seeds (n = 50) or 1 gram of a cellulose placebo (n = 50) twice daily for 28 days. Serum prolactin increased from 75 to 192 (units not specified) in the Nigella group which was slightly greater than in the control group. Babies in both groups gained weight, length and head circumference, but no difference was seen between the two groups. There were also no changes in maternal serum hemoglobin, creatinine, AST and ALT levels or differences between the groups.[9]

### References

1 Sayed NZ, Deo R, Mukundan U. Herbal remedies used by Warlis of Dahanu to induce lactation in nursing mothers. Indian J Tradit Knowl 2007;6:602–5. https://nopr.niscpr.res.in/handle/123456789/1009
2 Agrawala IP, Achar MVS, Boradkar RV, et al. Galactagogue action of Cuminum cyminum and Nigella sativa. Indian J Med Res 1968;56:841–4.5693882
3 Javan R, Javadi B, Feyzabadi Z. Breastfeeding: A review of its physiology and galactogogue plants in view of traditional Persian medicine. Breastfeed Med 2017;12:401–9.28714737
4 Dandotiya H, Singh G, Kashaw SK. The galactagogues use by Indian tribal communities to over come poor lactation. Int J Biotechnol Bioeng Res 2013;4:243–8. http://www.ripublication.com/Volume/ijbbrv4n3spl.htm
5 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
6 Choudhury J, Bora J, Baruah D, et al. Portrayal of folk medicinal practices among the indigenous people of north Tripura district of Tripura, India. Int J Res Ayurveda Pharm 2014;5:480–8. doi:10.7897/2277-4343.05499
7 Eid AM, Jaradat N. Public knowledge, attitude, and practice on herbal remedies used during pregnancy and lactation in West Bank Palestine. Front Pharmacol 2020;11:46.32116721
8 Zulkefli AF, Idrus RBH, Hamid AA. Nigella sativa as a galactagogue: A systematic review. Sains Malays 2020;49:1719–27. doi:10.17576/jsm-2020-4907-22
9 Khan S, Anas M, Khan DI, et al. The effect of Shuneez (Nigella sativa) as galactogogue on mothers complaining of insufficient breast milk: A single-blind clinical trial. Adv Integr Med 2025;12:100481. doi:10.1016/j.aimed.2025.100481
10 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
11 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
12 Shariati M, Mamoori GA, Khadivzade T. The survey of effect of using "Shirafza Drop" by nursing mothers on weight gain (WG) of 0-6 months exclusively breastfed. Horizon Med Sci 2004;10:24–30. http://imtj.gmu.ac.ir/article-1-255-en.html

## Substance Identification

### Substance Name

Black Seed

### Scientific Name

Nigella sativa

### CAS Registry Number

90064-32-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal